# Doxorubicin

CASRN: 23214-92-8

## Drug Levels and Effects

### Summary of Use during Lactation

Most sources consider breastfeeding to be contraindicated during maternal antineoplastic drug therapy, especially anthracyclines such as doxorubicin.[1] It might be possible to breastfeed safely during intermittent therapy with an appropriate period of breastfeeding abstinence; however, the high levels and persistence of the active metabolite doxorubicinol in milk make defining an appropriate abstinence interval difficult. Some have suggested a breastfeeding abstinence period of 5 to 10 days after a dose.[2,3] More recent pharmacokinetic modeling using a worst-case scenario suggests that 13 days would be required to minimize both systemic and gut toxicity after the colostral phase.[4]

Chemotherapy may adversely affect the normal microbiome and chemical makeup of breastmilk.[5] Women who receive chemotherapy during pregnancy are more likely to have difficulty nursing their infant.

### Drug Levels

Maternal Levels. Doxorubicin, doxorubicinol and two other metabolites were detected in milk after administration of 70 mg/sq. m. (90 mg) of doxorubicin intravenously. Peak milk levels of 128 mcg/L of doxorubicin and 111 mcg/L of its active metabolite doxorubicinol occurred 24 hours after the dose. Both drugs were detectable in milk for at least 72 hours after the dose. Other metabolites were also detected in milk at lower levels.[6,7] Using these data, the breastfed infant in this case would have received an estimated 2% of maternal weight-adjusted dosage if he had been allowed to nurse throughout the 72 hours after the dose.

A woman was diagnosed with B-cell non-Hodgkins lymphoma at 4 months postpartum. She received R-CHOP therapy every 21 days for 6 cycles. It consisted of rituximab 375 mg/sq. m, cyclophosphamide 750 mg/sq. m., doxorubicin 50 mg/sq. m., vincristine 1.4 mg/sq. m. (capped at 2 mg) plus prednisone 40 mg/sq. m. daily. She also received oral 300 mg of allopurinol daily during the whole therapy course. Milk samples were collected twice daily during the first 3 cycles then once daily for the remaining cycles for a total of 290 samples. Doxorubicin was detectable in milk shortly after administration, with the peak milk level of about 300 mcg/L occurring in the first few hours after the first dose. After doses 2 and 3, peak milk levels were about 105 mcg/L. Doxorubicin concentrations fell slowly and were still detectable on day 21 at about 5 mcg/L. Peak levels of the active metabolite, doxorubicinol occurred on about day 2 to 3 after the dose and were about 700 mcg/L after the first dose and about 200 mcg/L after the second and third doses. Doxorubicinol concentrations fell slowly and were still detectable on day 21 at about 20 to 40 mcg/L. The authors suggested a 6-week time period from the last dose of a regimen until breastfeeding is resumed.[8]

A woman with breast cancer diagnosed during pregnancy received chemotherapy beginning a few days after delivery. It consisted of doxorubicin 118 mg and cyclophosphamide 1180 mg every 2 weeks for 4 cycles, followed by paclitaxel 156 mg weekly and carboplatin 900 mg every 4 weeks. She collected 97 milk samples. A second patient was diagnosed with breast cancer 6.5 months postpartum. Her treatment consisted of doxorubicin 130 mg and cyclophosphamide 1300 mg every 2 weeks for 4 cycles, followed by paclitaxel weekly and carboplatin every 4 weeks. She collected 15 milk samples. A selection of 30 samples from the two patients were analyzed for doxorubicin after their first cycles of therapy. Peak milk levels after the first round of chemotherapy were about 295 mcg/L in the first patient and about 240 mcg/L in the second. Levels decreased to less than 20 mcg/L by about 4 days after the dose and to unmeasurable levels (<1 mcg/L) by day 8 after the dose. The authors calculated the time for the milk concentration to reach a relative infant dosage (RID) level below 1% to be 3 days; however, the longer-acting active metabolite, doxorubicinol, was not measured in milk.[3] A further pharmacokinetic analysis of all breastmilk samples found that doxorubicin levels in milk decrease slowly and that milk should be discarded for 3 to 6 days after each dose in a cycle to achieve a cumulative relative infant dosage of <1% of doxorubicin. However, this estimate did not include the presence of active metabolite(s) in milk, so this time represents the minimum time to withhold breastfeeding.[9]

The same authors developed a physiologically based pharmacokinetic model for doxorubicin. Assuming the worst-case scenario, the model predicted reductions of infant peripheral blood exposure of 60%, 72%, and 79% when milk was discarded for 1, 2, or 3 days after the maternal dose, respectively. In addition, the model predicted that it would take 13 days for the gut concentration to fall below the IC_50_ for cell death. However, these values apply only to mature milk and not necessarily to colostrum.[4]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A woman was diagnosed with B-cell lymphoma at 27 weeks of pregnancy. Labor was induced at 34 4/7 weeks and treatment was begun with a standard regimen of rituximab, cyclophosphamide, doxorubicin, vincristine, and prednisone in unspecified doses on a 21-day cycle, starting on day 2 postpartum. She pumped and discarded her milk and fed her infant donor milk for the first 10 days of each cycle and then breastfed her infant for the remaining 10 days before the next treatment cycle. The 10-day period of breastfeeding abstinence was determined by using about 3 half-lives of vincristine. After completion of 4 cycles of chemotherapy, her infant was reportedly healthy and developing without any complications.[10]

### Effects on Lactation and Breastmilk

A study of adolescent males who had received chemotherapy for childhood malignancies found that having received doxorubicin was associated with elevated serum prolactin concentrations.[11]

A woman diagnosed with Hodgkin's lymphoma during the second trimester of pregnancy received 3 rounds of chemotherapy during the third trimester of pregnancy and resumed chemotherapy 4 weeks postpartum. Milk samples were collected 15 to 30 minutes before and after chemotherapy for 16 weeks after restarting. The regimen consisted of doxorubicin 40 mg, bleomycin 16 units, vinblastine 9.6 mg and dacarbazine 600 mg, all given over a 2-hour period every 2 weeks. The microbial population and metabolic profile of her milk were compared to those of 8 healthy women who were not receiving chemotherapy. The breastmilk microbial population in the patient was markedly different from that of the healthy women, with increases in Acinetobacter sp., Xanthomonadacae and Stenotrophomonas sp. and decreases in Bifidobacterium sp. and Eubacterium sp. Marked differences were also found among numerous chemical components in the breastmilk of the treated woman, most notably DHA and inositol were decreased.[5]

A telephone follow-up study was conducted on 74 women who received cancer chemotherapy at one center during the second or third trimester of pregnancy to determine if they were successful at breastfeeding postpartum. Only 34% of the women were able to exclusively breastfeed their infants, and 66% of the women reported experiencing breastfeeding difficulties. This was in comparison to a 91% breastfeeding success rate in 22 other mothers diagnosed during pregnancy, but not treated with chemotherapy. Other statistically significant correlations included: 1. mothers with breastfeeding difficulties had an average of 5.5 cycles of chemotherapy compared with 3.8 cycles among mothers who had no difficulties; and 2. mothers with breastfeeding difficulties received their first cycle of chemotherapy on average 3.4 weeks earlier in pregnancy. Of the 62 women who received a doxorubicin-containing regimen, 39 had breastfeeding difficulties.[12]

### References

1 Pistilli B, Bellettini G, Giovannetti E, et al. Chemotherapy, targeted agents, antiemetics and growth-factors in human milk: How should we counsel cancer patients about breastfeeding? Cancer Treat Rev 2013;39:207-11.23199900
2 Johnson HM, Mitchell KB. ABM clinical protocol #34: Breast cancer and breastfeeding. Breastfeed Med 2020;15:429-34.32516007
3 Damoiseaux D, Calpe S, Rosing H, et al. Presence of 5 chemotherapeutic drugs in breast milk as a guide for the safe use of chemotherapy during breastfeeding: Results from a case series. Clin Pharmacol Ther 2022;112:404-10.35486426
4 Damoiseaux D, Amant F, Beijnen JH, et al. Physiologically-based pharmacokinetic model to predict doxorubicin and paclitaxel exposure in infants through breast milk. CPT Pharmacometrics Syst Pharmacol 2023;12:1931-44.37798909
5 Urbaniak C, McMillan A, Angelini M, et al. Effect of chemotherapy on the microbiota and metabolome of human milk, a case report. Microbiome 2014;2:24.25061513
6 Egan PC, Costanza M, Dodion P, et al. Secretion of doxorubicin (DOX) and cisplatin (DDP) into human milk. Proc ASCO 1984;3:21.
7 Egan PC, Costanza ME, Dodion P, et al. Doxorubicin and cisplatin excretion into human milk. Cancer Treat Rep 1985;69:1387-9.4075315
8 Codacci-Pisanelli G, Honeywell RJ, Asselin N, et al. Breastfeeding during R-CHOP chemotherapy: Please abstain! Eur J Cancer 2019;119:107-11.31437753
9 Damoiseaux D, Centanni D, Beijnen JH, et al. Predicting chemotherapy distribution into breast milk for breastfeeding women using a population pharmacokinetic approach. Clin Pharmacokinet 2023;62:969-80.37154994
10 Hersey AE, Giglio P, Kurt H, et al. Diffuse large B-cell lymphoma during third-trimester pregnancy and lactation. Obstet Gynecol 2020;135:383-6.31923071
11 Siimes MA, Ropponen P, Aalberg V, et al. Prolactinemia in adolescent males surviving malignancies in childhood: Impaired dating activity. J Adolesc Health 1993;14:543-7.8312290
12 Stopenski S, Aslam A, Zhang X, Cardonick E. After chemotherapy treatment for maternal cancer during pregnancy, is breastfeeding possible? Breastfeed Med 2017;12:91-7.28170295

## Substance Identification

### Substance Name

Doxorubicin

### CAS Registry Number

23214-92-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antineoplastic Agents

Anthracyclines

Antibiotics, Antineoplastic

Topoisomerase II Inhibitors